# Nedosiran

CASRN: 2266591-83-5

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of nedosiran sodium during breastfeeding. Because nedosiran is more than 85.6% bound to plasma proteins and has a molecular weight of 22,238 Da, the amount in milk is likely to be low. In addition, because nedosiran is poorly absorbed orally, it is not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants. The drug is approved for use in children as young as 2 years old. If the mother requires nedosiran sodium, it is not a reason to discontinue breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Nedosiran Sodium

### CAS Registry Number

2266591-83-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

RNA, Small Interfering